# Ranitidine

CASRN: 66357-35-5

## Drug Levels and Effects

### Summary of Use during Lactation

Although interpatient variability exists, the dose of ranitidine in breastmilk is less than the dose used in newborn infants. Ranitidine itself is not a concern during breastfeeding, but it can break down to a toxic compound if not formulated and stored properly. An alternate drug might be preferred.

### Drug Levels

Maternal Levels. Six women with established lactation who were 6 to 10 days postpartum were given a single dose of 150 mg of ranitidine orally. Average milk levels were 1.28, 1.42 and 1.02 mg/L at 2, 4 and 8 hours, respectively, after the dose; however, there was great interpatient variability in both peak levels and the time of the peak.[1]

After 5 oral doses of ranitidine 150 mg every 12 hours in a 54-day postpartum woman, the highest measured milk level occurred 5.5 hours after the 5th dose and was 2.6 mg/L. The estimated half-life in milk was 2.9 hours.[2]

Using the average peak milk level data from these 2 papers, an exclusively breastfed infant would receive an estimated maximum of 300 mcg/kg daily with a maternal dosage of 150 mg daily. This dosage is 20% of the dosage used intravenously in newborn infants for stress ulcer prophylaxis.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

One 54-day-old breastfed infant had no observable adverse effects after maternal ingestion of ranitidine 150 mg every 12 hours for 2 days.[2]

### Effects on Lactation and Breastmilk

Histamine H2-receptor blockade is known to stimulate prolactin secretion.[3] Ranitidine in intravenous doses over 100 mg or during long-term oral use have increased serum prolactin in some studies, and rare cases of gynecomastia have been reported.[4-8] The prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### Alternate Drugs to Consider

Antacids, Cimetidine, Famotidine, Omeprazole, Pantoprazole, Sucralfate

### References

1 Riley AJ, Crowley P, Harrison C. Transfer of ranitidine to biological fluids: Milk and semen. In: Misiewicz J, Wormsley K, eds. The clinical use of ranitidine. Oxford: Medicine Publishing Foundation; 1982:78-81.
2 Kearns GL, McConnell RF, Jr, Trang JM, et al. Appearance of ranitidine in breast milk following multiple dosing. Clin Pharm 1985;4:322-4.4039999
3 Knigge UP. Histaminergic regulation of prolactin secretion. Dan Med Bull 1990;37:109-24.2188799
4 Perret G, Hugues JN, Louchahi M, et al. Effect of a short-term oral administration of cimetidine and ranitidine on the basal and thyrotropin-releasing hormone-stimulated serum concentrations of prolactin, thyrotropin and thyroid hormones in healthy volunteers. A double-blind cross-over study. Pharmacology 1986;32:101-8.3081918
5 Delitala G, Devilla L, Pende A, et al. Effects of the H2 receptor antagonist ranitidine on anterior pituitary hormone secretion in man. Eur J Clin Pharmacol 1982;22:207-11.6125393
6 Knigge U, Wollesen F, Dejgarrd A, et al. Comparison between dose-responses of prolactin, thyroid stimulating hormone and growth hormone to two different histamine H-2 receptor antagonists in normal men. Clin Endocrinol (Oxf) 1981;15:585-92.6276054
7 Tosi S, Cagnoli M. Painful gynecomastia with ranitidine. Lancet 1982;2:160.6123872
8 Bera F, Jonville-Bera AP, Doustin P, et al. Impotence and gynecomastia secondary to hyperprolactinemia induced by ranitidine. Therapie 1994;49:361-2.7878608

## Substance Identification

### Substance Name

Ranitidine

### CAS Registry Number

66357-35-5

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-Ulcer Agents

Histamine H2 Antagonists

Gastrointestinal Agents